# Elagolix

CASRN: 834153-87-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of elagolix during breastfeeding. Because elagolix is 80% bound to plasma proteins, the amount in milk is likely to be low. However, because no information is available on the use of elagolix during breastfeeding caution should be used, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Elagolix

### CAS Registry Number

834153-87-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

GnRH Receptor Antagonists

Gonadotropin-Releasing Hormone Antagonists